# Avacincaptad Pegol

CASRN: 1491144-00-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of avacincaptad pegol during breastfeeding. Since only a small dose in injected intravitreally into the eye, it is unlikely that a clinically relevant amount would reach the infant in breastmilk.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Avacincaptad Pegol

### CAS Registry Number

1491144-00-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complement Inactivating Agents